# Minoxidil

CASRN: 38304-91-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the minimal amount of information on this potent agent, use oral minoxidil with caution, particularly when therapy involves a large maternal dosage or breastfeeding a newborn. Maternal topical minoxidil is acceptable once breastfeeding is established.[1] Avoid contact between the infant and skin treated with minoxidil because it can be absorbed by the infant and cause adverse effects such as excessive hair growth.

### Drug Levels

Maternal Levels. In one case report, a 2-month-postpartum mother who was taking minoxidil 5 mg twice daily was given an oral dose of 7.5 mg. The peak milk level of minoxidil plus glucuronide conjugate was 45.1 mcg/L one hour after the dose. Milk levels paralleled serum levels, falling rapidly after the first hour to a concentration of 12.4 mcg/L at 3 hours, 4 mcg/L at 6 hours, 1.9 mcg/L at 9 hours, 0.8 mcg/L at 12 hours after the dose.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

No hypertrichosis or other abnormal signs were seen in one infant breastfed (extent not stated) for 2 months of maternal minoxidil 5 mg twice daily by mouth. The mother was taking the drug throughout pregnancy and postpartum and the infant was born at 37 weeks of gestation.[2]

Another breastfed (extent not stated) infant who was born 4 weeks preterm developed facial hypertrichosis while her mother was using 5% minoxidil topically twice a day. The infant appeared normal at 2 weeks of age, but had considerable black hair on the forehead at 2 months of age. The mother discontinued minoxidil and at 6 months of age, the infant had lost the excess hair. The time course of minoxidil use and hair growth was not clearly specified in the report.[3] The reaction was possibly caused by minoxidil in milk, but no documentation of maternal or infant serum levels or milk levels was made and normal transient neonatal hypertrichosis is the possible cause.

A retrospective study of cases reported to the WHO adverse reaction database, VigiBase, found a total of 45 reports of hypertrichosis in infants attributed to minoxidil. In addition, 11 cases of infantile hypertrichosis or “werewolf syndrome” were reported in Spain, characterized by excessive, fur-like growth of body hair. It is thought that widespread use of topical minoxidil in these countries was responsible. It was suspected that the drug was inadvertently absorbed via skin-to-skin contact or accidentally ingested by the infants through breastmilk or other unknown sources.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Lyons CE, Smith AD, Schwartzman G, et al. Managing skin diseases that flare during pregnancy and in the postpartum period: Part 2- Management & safety considerations. J Am Acad Dermatol 2026 41692217
2 Valdivieso A, Valdés G, Spiro TE, et al. Minoxidil in breast milk. Ann Intern Med 1985;102:135.3966734
3 Trüeb RM, Caballero-Uribe N. Minoxidil-induced hypertrichosis in a breastfed infant. J Eur Acad Dermatol Venereol 2022;36:e224–e5.34657321
4 Suresh J, Saxena R, Vivekanandan K. Understanding the safety profile of topical minoxidil: A retrospective review. Arch Dermatol Res 2025;318:21. doi:10.1007/s00403-025-04469-4

## Substance Identification

### Substance Name

Minoxidil

### CAS Registry Number

38304-91-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Vasodilator Agents